# Telaprevir

CASRN: 402957-28-2

## Drug Levels and Effects

### Summary of Use during Lactation

Telaprevir is no longer marketed in the United States and has not been studied in nursing mothers. Because it must be used with ribavirin and peginterferon alfa, it is not considered a good choice during breastfeeding. When it was marketed, the manufacturer recommended that mothers taking telaprevir not breastfeed their infants.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hepatitis C) Interferon Alfa, Interferon Alfacon-1, Peginterferon Alfa, Sofosbuvir

## Substance Identification

### Substance Name

Telaprevir

### CAS Registry Number

402957-28-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiviral Agents